# Dorzolamide

CASRN: 120279-96-1

## Drug Levels and Effects

### Summary of Use during Lactation

Limited experience with the use of ophthalmic dorzolamide indicate that it is unlikely to adversely affect the breastfed infant.[1] French guidelines recommend ophthalmic carbonic anhydrase inhibitor drops as a preferred therapy for glaucoma during breastfeeding.[2] To substantially diminish the amount of drug that reaches the breastmilk after using eye drops, place pressure over the tear duct by the corner of the eye for 1 minute or more, then remove the excess solution with an absorbent tissue.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

A newborn infant was breastfed during maternal therapy with various combinations of ocular timolol, dipivifrin, dorzolamide, brimonidine and several doses of acetazolamide. Ultimately, the mother was treated with timolol gel-forming solution 0.5% and dorzolamide 2% drops. The drugs were given immediately following breastfeeding with punctal occlusion and no apnea or bradycardia was observed in the infant.[3]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Belkin A, Chen T, DeOliveria AR, et al. (2020). A practical guide to the pregnant and breastfeeding patient with glaucoma. Ophthalmol Glaucoma.
2 Blumen-Ohana E, Sellem E. (2020). J Fr Ophtalmol.
3 Johnson SM, Martinez M, Freedman S. (2001). Management of glaucoma in pregnancy and lactation. Surv Ophthalmol.

## Substance Identification

### Substance Name

Dorzolamide

### CAS Registry Number

120279-96-1

### Drug Class

Breast Feeding

Lactation

Antiglaucoma Agents

Carbonic Anhydrase Inhibitors